# Piperaquine

CASRN: 4085-31-8

## Drug Levels and Effects

### Summary of Use during Lactation

Piperaquine is not approved for marketing in the United States by the U.S. Food and Drug Administration, but is available in other countries. Amounts in milk are very low and should not affect the breastfed infant.

### Drug Levels

Maternal Levels. Twenty-seven women received 3 doses containing 320 mg of piperaquine combined with dihydroartemisinin or sulfadoxine-pyrimethamine. Breastmilk was sampled on days 1, 2, 3 to 5, 7 to 11, and 14 to 17 after delivery. Serum concentration data were analyzed using a population pharmacokinetic model (NONMEM) and breastmilk concentrations were estimated from plasma concentrations using the milk-to-plasma ratio. The estimated absolute daily infant dosage was 0.41 mcg/kg, which corresponds to a relative infant dose of 0.004%. The maximum simulated relative infant dosage from any dosing scenario was 2.5%.[1]

A physiologically based pharmacokinetic model has been developed that adequately predicts piperaquine excretion into breastmilk.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Atovaquone and Proguanil, Chloroquine, Doxycycline, Mefloquine

### References

1 Moore BR, Salman S, Benjamin J, et al. Pharmacokinetics of piperaquine transfer into the breast milk of Melanesian mothers. Antimicrob Agents Chemother 2015;59:4272-8.25963980
2 Almond LM, Abduljalil K, Pansari A, et al. PBPK-led assessment of antimalarial drug concentrations in breastmilk: A strategy for optimal use of prediction methods to guide decision making in an understudied population. CPT Pharmacometrics Syst Pharmacol 2025;14:738–50.39930940

## Substance Identification

### Substance Name

Piperaquine

### CAS Registry Number

4085-31-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-infective Agents

Antiparasitic Agents

Antimalarials

Antiprotozoal Agents